# Dimenhydrinate

CASRN: 523-87-5

## Drug Levels and Effects

### Summary of Use during Lactation

Small, occasional doses of dimenhydrinate would not be expected to cause any adverse effects in breastfed infants. Larger doses or more prolonged use may cause effects in the infant or decrease the milk supply, particularly in combination with a sympathomimetic such as pseudoephedrine or before lactation is well established. Single bedtime doses after the last feeding of the day may be adequate for many women and will minimize any effects of the drug.

### Drug Levels

Dimenhydrinate is the 8-chlortheophyllinate salt of diphenhydramine.

Maternal Levels. One old study that used a biologic assay system reported that after a 100 mg intramuscular dose of diphenhydramine in four women, drug levels in milk were undetectable in two and 42 and 100 mcg/L in two others at one hour after the dose. Five hours after the dose, milk levels were undetectable in two women and 20 and 100 mcg/L in two others.[1] No studies using modern assay methods have been reported.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on dimenhydrinate was not found as of the revision date. In one telephone follow-up study, mothers reported irritability and colicky symptoms 10% of infants exposed to various antihistamines and drowsiness was reported in 1.6% of infants. None of the reactions required medical attention. In this study, irritability was reported in one infant of seven exposed to dimenhydrinate in breastmilk.[2]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[3,4] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[3] Whether lower oral doses of antihistamines have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One woman became dependent on dimenhydrinate during her first pregnancy and continued to take it in a dose of 150 mg daily while she breastfed her infant for 3 months. The infant did well except for a febrile seizure at 2 years of age, which was probably unrelated to dimenhydrinate. During her second pregnancy, she took dimenhydrinate 300 mg daily during the pregnancy and while breastfeeding her infant for 2 years.[5]

### Alternate Drugs to Consider

Meclizine

### References

1 Rindi V. (1951). La eliminazione degli antistaminici di sintesi con il latte e l'azione latto-goga de questi. Riv Ital Ginecol.
2 Ito S, Blajchman A, Stephenson M, et al. (1993). Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol.
3 Messinis IE, Souvatzoglou A, Fais N, et al. (1985). Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest.
4 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. (1981). The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab.
5 Kaya FD. (2014). A patient with dimenhydrinate dependence: A case report. Klin Psikofarmakol Bull.

## Substance Identification

### Substance Name

Dimenhydrinate

### CAS Registry Number

523-87-5

### Drug Class

Breast Feeding

Lactation

Antihistamines

Antiemetics

Gastrointestinal Agents